# Flunitrazepam

CASRN: 1622-62-4

## Drug Levels and Effects

### Summary of Use during Lactation

Flunitrazepam is not approved for marketing in the United States by the U.S. Food and Drug Administration. It is excreted into breastmilk and, because of its long half-life of about 20 hours, it may accumulate in the serum of breastfed infants with repeated doses. Other agents are preferred, especially while nursing a newborn or preterm infant.[1] If flunitrazepam is used long-term, monitor the infant for sedation, poor feeding and poor weight gain. After a single dose of flunitrazepam, as for sedation before a procedure, there is usually no need to wait to resume breastfeeding, although with a newborn or preterm infant, a cautious approach would be to wait a period of 6 to 8 hours before resuming nursing.

### Drug Levels

Flunitrazepam is metabolized to the active metabolite norflunitrazepam.

Maternal Levels. Five nursing mothers were given a single oral dose of flunitrazepam 2 mg (66 mcg/kg) at 8 pm. Milk samples were collected 11, 15 and 27 hours later. The average flunitrazepam concentrations in milk were 2 mcg/L at 11 hours after the dose, 1.7 mcg/L at 15 hours after the dose, and 0.6 mcg/L at 27 hours after the dose. Norflunitrazepam was not detectable (<0.2 mcg/L) in milk at any of these times.[2,3] From these data, it is estimated that a fully breastfed infant would receive about 1% of the maternal weight-adjusted dosage.[4]

Two women who were taking oral flunitrazepam donated milk samples between 3 and 6 days postpartum at 2 hours after a dose at the estimated peak serum concentration and just before a dose. One woman who was taking a dose of 1 mg daily had a 2-hour milk level of 2.48 mcg/L and a trough milk level of 0.524 mcg/L. The other woman was taking a dose of 2 mg daily. She had a 2-hour milk level of 4.09 mcg/L and a trough milk level of 1.48 mcg/L. Norflunitrazepam was not measured.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Lorazepam, Oxazepam, Temazepam

### References

1 Bascoul C, Franchitto L, Parant O, Raynaud JP. Psychotropic drugs during pregnancy and lactation: Development practice. Presse Med 2015;44:271–83.25595818
2 Kanto J, Aaltonen L, Kangas L, et al. Placental transfer and breast milk levels of flunitrazepam. Curr Ther Res 1979;26:539-46.
3 Kanto JH. Use of benzodiazepines during pregnancy, labour and lactation, with particular reference to pharmacokinetic considerations. Drugs 1982;23:354-80.6124415
4 Chisholm CA, Kuller JA. A guide to the safety of CNS-active agents during breastfeeding. Drug Saf 1997;17:127-42.9285203
5 Nishimura A, Furugen A, Umazume T, et al. Benzodiazepine concentrations in the breast milk and plasma of nursing mothers: Estimation of relative infant dose. Breastfeed Med 2021;16:424-31.33449825

## Substance Identification

### Substance Name

Flunitrazepam

### CAS Registry Number

1622-62-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives

Anti-Anxiety Agents

Benzodiazepines